# Capsicum

CASRN: 84625-29-6

## Drug Levels and Effects

### Summary of Use during Lactation

Cayenne peppers (Capsicum species) contain capsaicin and related compounds which cause the hot, spicy flavor, as well as numerous other components. Capsicum has no specific lactation-related uses. It appears that Capsicum components can be excreted into milk in amounts that affect breastfed infants because skin rashes have been reported in the breastfed infants of women who ate foods spiced with red peppers.[1] Capsaicin is used topically for pain. Application of Capsicum or capsaicin to the mother's skin should not affect the infant as long as the infant's skin does not come into direct contact with the areas of skin that have been treated. However, severe pain has been reported in an infant who ingested capsaicin from the mother’s skin.[2] Do not apply capsaicin cream to the breast or other parts of the body that the infant might contact. Capsicum may increase the risk of bleeding and should be used cautiously in patients taking anticoagulant or antiplatelet medications. Cross reactions can occur in those allergic to members of the Solanaceae family of plants (e.g., potatoes, tomatoes, paprika, Jimson weed). Prolactin elevation from breastfeeding can decrease the sensation of pain from capsaicin in nursing mothers.[3]

Capsicum is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two breastfed infants developed dermatitis after their mothers ingested gimchee (kimchi) that was mildly to moderately flavored with red pepper. One was a 6-month-old girl who developed an erythematous rash across the chest and neck. The reaction occurred after 3 nursing bouts within 12 hours of the maternal ingestion of gimghee. The rash gradually remitted over the next 48 hours. In the other case, a 6-month-old boy developed an erythematous dermatitis on the upper forehead and a more severe dermatitis near the eyebrows within 15 hours of nursing, followed by desquamation within 24 hours. Resolution of the reaction took about 5 days. A second, milder reaction occurred in the same areas of the infant's face 2 months later when his mother ingested a squid dish mildly flavored with red pepper. The authors report discussions with two physicians from Korea who stated that these types of reactions are seen occasionally and well known in Korea. They stated that the reactions usually start about 12 hours after nursing and persist for 24 to 48 hours for mild reactions and up to 10 days for more severe reactions. Irritation around the anus is also seen.[1] Both reactions were probably cause by maternal red pepper ingestion.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Cooper RL, Cooper MM. (1996). Red pepper-induced dermatitis in breast-fed infants. Dermatology.
2 Lassen CL, Meyer K, Bredthauer A, et al. (2020). Facial and oral cross-contamination of a 3-year-old child with high concentration capsaicin: A case report. A A Pract.
3 Street LM, Harris L, Curry RS, et al. (2019). Capsaicin-induced pain and sensitisation in the postpartum period. Br J Anaesth.

## Substance Identification

### Substance Name

Capsicum

### Scientific Name

Capsicum frutescens Capsicum annuum Capsicum chinense Capsicum baccatum Capsicum pubescens Capsicum minimum

### CAS Registry Number

84625-29-6

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal